# Ziprasidone

CASRN: 146939-27-7

## Drug Levels and Effects

### Summary of Use during Lactation

Because there is little published experience with ziprasidone during breastfeeding, other antipsychotic agents may be preferred, especially while nursing a newborn or preterm infant. A safety scoring system finds ziprasidone possible to use cautiously during breastfeeding.[1] Infants breastfed during maternal use of ziprasidone should be monitored for excess sedation, irritability, poor feeding, and extrapyramidal symptoms, such as tremors and abnormal muscle movements.

### Drug Levels

Maternal Levels. In one woman, ziprasidone was started at 9 days postpartum (dosage not stated, but presumably at a low dose and titrated upward). Serum and milk concentrations were obtained 10 minutes before the morning dose every day for 16 days. By day 7 of therapy, the patient was taking 80 mg of ziprasidone twice daily. Ziprasidone was not detectable in milk until day 10 of therapy when the milk concentration was 11 mcg/L; thereafter, the milk concentrations were not quantifiable (<10 mcg/L).[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A woman took ziprasidone 40 mg and citalopram 60 mg daily throughout pregnancy and postpartum. She breastfed extensively, except for occasional formula feedings by others. At 6 months of age, a pediatrician found the infant to be healthy with normal growth and development.[3]

Patients enlisted in the National Pregnancy Registry for Atypical Antipsychotics who were taking a second-generation antipsychotic drug while breastfeeding (n = 576) were compared to control breastfeeding patients who were not treated with a second-generation antipsychotic (n = 818). Of the patients who were taking a second-generation antipsychotic drug, 60.4% were on more than one psychotropic. A review of the pediatric medical records, no adverse effects were noted among infants exposed or not exposed to second-generation antipsychotic monotherapy or to polytherapy.[4] The number of women taking ziprasidone was not reported.

### Effects on Lactation and Breastmilk

Prolactin elevation has occurred during ziprasidone treatment,[5-10] and galactorrhea has been reported, often in adolescents.[7-12] However, prolactin elevation might be more transient and less severe than with phenothiazines.[13-15] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

Patients enlisted in the National Pregnancy Registry for Atypical Antipsychotics who were taking a second-generation antipsychotic drug while breastfeeding (n = 576) were compared to control breastfeeding patients who had primarily diagnoses of major depressive disorder and anxiety disorders, most often treated with SSRI or SNRI antidepressants, but not with a second-generation antipsychotic (n = 818). Among women on a second-generation antipsychotic, 60.4% were on more than one psychotropic compared with 24.4% among women in the control group. Of the women on a second-generation antipsychotic, 59.3% reported “ever breastfeeding” compared to 88.2% of women in the control group. At 3 months postpartum, 23% of women on a second-generation antipsychotic were exclusively breastfeeding compared to 47% of women in the control group.[4] The number of women taking ziprasidone was not reported.

### Alternate Drugs to Consider

Haloperidol, Olanzapine, Quetiapine, Risperidone

### References

1 Uguz F. A new safety scoring system for the use of psychotropic drugs during lactation. Am J Ther 2021;28:e118-e26.30601177
2 Schlotterbeck P, Saur R, Hiemke C, et al. Low concentration of ziprasidone in human milk: A case report. Int J Neuropsychopharmacol 2009;12:437-8.19203410
3 Werremeyer A. Ziprasidone and citalopram use in pregnancy and lactation in a woman with psychotic depression. Am J Psychiatry 2009;166:1298.19884241
4 Viguera AC, Vanderkruik R, Gaccione P, et al. Breastfeeding practices among women taking second-generation antipsychotics: Findings from the National Pregnancy Registry for Atypical Antipsychotics. Arch Womens Ment Health 2022;25:511-6.34318375
5 Ginsberg DL. Ziprasidone-induced galactorrhea. Prim Psychiatry 2003;10:22-3.
6 Ginsberg DL. Ziprasidone-induced hyperprolactinemia. Prim Psychiatry 2004;11:26-7.
7 Jordan MP. Ziprasidone-associated galactorrhea in a female teenager. J Am Acad Child Adolesc Psychiatry 2003;42:4-5.12500070
8 Kopecek M, Bares M, Mohr P. Ziprasidone-induced galactorrhea: A case report. Neuro Endocrinol Lett 2005;26:69-70.15726024
9 Ramadan M, Khan A, Preskorn S. D2-blockade and possible ziprasidone-induced galactorrhea. Int Clin Psychopharmacol 2005;20:113-4.15729088
10 Saldaña SN, Delgado SV. Ziprasidone-associated galactorrhea in an adolescent female. J Child Adolesc Psychopharmacol 2007;17:259-60.17489723
11 Myers WT. A lacting adolescent on atypical antipsychotics: A case report of an emerging challenge. J Investig Med 2014;62:485. doi:10.2310/JIM.0000000000000055
12 Raza S, Haq F. Ziprasidone-induced galactorrhea in an adolescent female: A case report. Prim Care Companion J Clin Psych 2010;12:PCC.09l00855. doi:10.4088/PCC.09l00855gry
13 Goodnick PJ, Rodríguez L, Santana O. Antipsychotics: Impact on prolactin levels. Expert Opin Pharmacother 2002;3:1381-91.12387684
14 Maguire GA. Prolactin elevation with antipsychotic medications: Mechanisms of action and clinical consequences. J Clin Psychiatry 2002;63 (Suppl 4):56-62.11913677
15 Weiden PJ, Daniel DG, Simpson G, et al. Improvement in indices of health status in outpatients with schizophrenia switched to ziprasidone. J Clin Psychopharmacol 2003;23:595-600.14624190

## Substance Identification

### Substance Name

Ziprasidone

### CAS Registry Number

146939-27-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antipsychotic Agents